# Nystatin

CASRN: 1400-61-9

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information exists on the milk excretion of nystatin, it is virtually unabsorbed orally, therefore most reviewers and clinicians consider it acceptable for use in nursing mothers, including topical application to the nipples.[1-3] Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[4] Any excess cream should be removed from the nipples before nursing. Nystatin is less effective than other topical agents for the treatment of thrush.[5,6]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Systemic) Amphotericin B, Fluconazole; (Topical) Clotrimazole, Miconazole

### References

1 Mactal-Haaf C, Hoffman M, Kuchta A. (2001). Use of anti-infective agents during lactation, Part 3: Antivirals, antifungals, and urinary antiseptics. J Hum Lact.
2 Ilett KF, Kristensen JH. (2005). Drug use and breastfeeding. Expert Opin Drug Saf.
3 Brent NB. (2001). Thrush in the breastfeeding dyad: Results of a survey on diagnosis and treatment. Clin Pediatr (Phila).
4 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.
5 Huggins KE, Billon SF. (1993). Twenty cases of persistent sore nipples: Collaboration between lactation consultant and dermatologist. J Hum Lact.
6 Hoppe JE, Hahn H. (1996). Randomized comparison of two nystatin oral gels with miconazole oral gel for treatment of oral thrush in infants. Antimycotics Study Group. Infection.

## Substance Identification

### Substance Name

Nystatin

### CAS Registry Number

1400-61-9

### Drug Class

Breast Feeding

Lactation

Antifungal Agents